# Cipaglucosidase Alfa

CASRN: 2359727-71-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of cipaglucosidase alfa during breastfeeding. Because cipaglucosidase alfa is a large protein molecule with a molecular weight of about 110,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] However, the drug is given with miglustat, which has no safety information during breastfeeding, so the manufacturer recommends that neither drug be given to nursing mothers. An alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Alglucerase, Imiglucerase, Taliglucerase Alfa

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Cipaglucosidase Alfa

### CAS Registry Number

2359727-71-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy